# Strontium Chloride Sr 89

CASRN: 38270-90-5

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of strontium 89 as a therapeutic agent. No information is available on the therapeutic use of strontium 89 during breastfeeding. It has been estimated that about 9% of the strontium in the maternal bloodstream reaches breastmilk for another strontium isotope, strontium 90.[1] Because strontium can substitute for calcium in infant bones, the manufacturer and expert opinion recommend discontinuing breastfeeding before a nursing mother receives strontium 89 chloride.[2]

### Drug Levels

Strontium 89 decays by beta emission with a physical half-life of 50.5 days.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Harrison JD, Smith TJ, Phipps AW. Infant doses from the transfer of radionuclides in mothers' milk. Radiat Prot Dosimetry 2003;105:251-6.14526966
2 Bodei L, Lam M, Chiesa C, et al. EANM procedure guideline for treatment of refractory metastatic bone pain. Eur J Nucl Med Mol Imaging 2008;35:1934-40.18649080

## Substance Identification

### Substance Name

Strontium Chloride Sr 89

### CAS Registry Number

38270-90-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Strontium Radioisotopes